# Ferumoxytol

CASRN: 722492-56-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of ferumoxytol during breastfeeding; however, the drug has been given safely to neonates intravenously as a magnetic resonance contrast agent.[1] For additional information on iron use during breastfeeding, see the monograph on Iron Salts.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ferric Carboxymaltose, Ferric Derisomaltose, Iron Sucrose

### References

1 Bookwalter CA, McDonald RJ, Packard AT, et al. Contrast media in pregnant and lactating patients, from the AJR special series on contrast media. AJR Am J Roentgenol 2024;224:e2431415 39046138

## Substance Identification

### Substance Name

Ferumoxytol

### CAS Registry Number

722492-56-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Ferric Compounds

Hematinics

Iron Compounds